# Dipyrone

CASRN: 68-89-3

## Drug Levels and Effects

### Summary of Use during Lactation

After ingestion by the mother, dipyrone and its metabolites appear in breastmilk in rather large amounts. It is found in the blood and urine of breastfed infants and can cause pharmacological effects in the breastfed infant. One case of cyanotic episodes in a breastfed infant was attributed to dipyrone in breastmilk. The drug and metabolites are eliminated from the breastmilk by 48 hours after a dose.

Dipyrone is not approved for marketing in the United States by the U.S. Food and Drug Administration nor in Canada and many European countries because of its adverse reactions, including agranulocytosis. However, it is widely used in other countries during labor and breastfeeding.[1–4] The European Medicines Agency recommends that dipyrone not be used in nursing mothers; however, several drug consultation centers in Israel disagree.[5,6] One manufacturer recommends to withhold breastfeeding for 48 hours after a dose.[7] Safer alternatives are available for analgesia during breastfeeding.

### Drug Levels

Maternal Levels. A woman took 3 doses of dipyrone 500 mg orally, over a 16-hour period. The dipyrone concentration in breastmilk was 4.3 mg/L 24 hours after the last dose.[8]

Ten women who were 3 to 5 days postpartum were given a single dose of 1 gram of dipyrone orally. Milk concentrations of its four metabolites were measured in breastmilk. In 8 of the patients, milk samples were taken once between 2.5 to 5.5 hours after the dose; all 4 metabolites were detected in the milk of all mothers. The total concentration of all the metabolites averaged 20.5 mg/L at the times sampled. In 2 of the women, milk samples were obtained before drug administration and before each feeding for 3 days. By 48 hours after the dose all metabolites were absent from breastmilk.[9] Using data from the 2 mothers with extensive sampling, an exclusively breastfed infant would receive an average of 6.8% of the maternal weight-adjusted dipyrone dosage in the form of metabolites.

In a survey of breastmilk in a rural Chilean hospital, dipyrone was detectable in the breastmilk of 8 out of 15 mothers tested.[1]

Infant Levels. Dipyrone was detected in a breastfed infant’s serum and urine after his mother took 1500 mg of dipyrone over a 16-hour period. The infant’s dipyrone serum concentration was 3.2 mg/L and urine concentration was 3.74 mg/L.[8]

### Effects in Breastfed Infants

A 42-day-old breastfed infant had 2 cyanotic episodes within 30 minutes after his mother took 3 doses of dipyrone 500 mg orally, 18, 7 and 2 hours before the first episode. A third episode occurred 24 hours after admission to the hospital. Dipyrone was detected in the mother’s breastmilk 24 hours after the last dose and in the infant’s serum and urine. No explanation could be found for the cyanotic episodes other than dipyrone and after suspending maternal dipyrone intake, no further episodes occurred in the infant up to age 3 years. The reaction is rated as possibly caused by dipyrone in breastmilk.[8]

In a blinded study, mothers who were at least 3 days postpartum and requesting analgesia for postpartum uterine pain were given either 1 gram of dipyrone or placebo. The infants of mothers who received dipyrone cried fewer times and for shorter durations in the 14 hours after drug administration than the infants of mothers who received placebo. This effect was more apparent in infants who demand fed than in those who fed on a fixed schedule.[10] Although this study appears to demonstrate a pharmacologic effect in the infants from dipyrone in milk, there is no clear explanation for the change in infant behavior.

A multicenter case-control study in Brazil compared 231 children who developed leukemia before 2 years of age with 411 children with various other nonmalignant diseases. Mothers were interviewed to ascertain their analgesic use during pregnancy and lactation. Nursing mothers who took dipyrone during the three months after delivery had a 2-fold risk of having a child with acute lymphocytic leukemia and a 3.87-fold risk in having rearrangement of the MLL gene in infants under one year of age.[11]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Acetaminophen, Celecoxib, Diclofenac, Flurbiprofen, Ibuprofen, Indomethacin, Naproxen, Piroxicam

### References

1 Aquino R, Barrios C, Lobos C, . Measurement of nicotine, cotinine and caffeine by GC-NPD-MS in human breast milk samples of puerperals hospitalized in “Las Higueras”, Talcahuano, Chile. Rev Toxicol 2006;23:108–12.
2 Sabo A, Stanulovic M, Jakovljevic V, . Collaborative study on drug use in pregnancy: The results of the follow-up 10 years after (Novi Sad Centre). Pharmacoepidemiol Drug Saf 2001;10:229–35.11501336
3 A multicenter study of drug use during pregnancy in Spain (IV). The drugs used during lactation. The DUP working group Spain. Med Clin (Barc) 1992;98:726–30.1608277
4 Prakash O, Mathur GP, Kushwaha KP, . Drug exposure in pregnant and lactating mothers in periurban areas. Indian Pediatr 1990;27:1301–2.2093678
5 European Medicines Agency. EMA recommends aligning doses of metamizole medicines and their use during pregnancy and breastfeeding. 2018. https://www.ema.europa.eu/documents/press-release/ema-recommends-aligning-doses-metamizole-medicines-their-use-during-pregnancy-breastfeeding_en.pdf
6 Dinavitser N. Dipyrone-a good medication with a bad reputation. J Med Toxicol 2020 16:78. doi:10.1007/s13181-019-00743-w
7 Bar-Oz B, Bulkowstein M, Benyamini L, . Use of antibiotic and analgesic drugs during lactation. Drug Saf 2003;26:925–35.14583068
8 Rizzoni G, Furlanut M. Cyanotic crisis in a breast-fed infant from mother taking dipyrone. Hum Toxicol 1984;3:505–7.6526398
9 Zylber-Katz E, Linder N, Granit L, . Excretion of dipyrone metabolites in human breast milk. Eur J Clin Pharmacol 1986;30:359–61.3732376
10 Linder N, German B, Bessant D, . The pharmacological effect on term neonates of analgesic drugs ingested through maternal milk. Can J Clin Pharmacol 1997;4:112–4.
11 Couto AC, Ferreira JD, Pombo-de-Oliveira MS, . Pregnancy, maternal exposure to analgesic medicines, and leukemia in Brazilian children below 2 years of age. Eur J Cancer Prev 2015;24:245–52.25121973

## Substance Identification

### Substance Name

Dipyrone

### CAS Registry Number

68-89-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesic Agents

Anti-inflammatory Agents, Nonsteroidal